# Trimethoprim-Sulfamethoxazole

CASRN: 8064-90-2

## Drug Levels and Effects

### Summary of Use during Lactation

Amouts of trimethoprim and sulfamethoxazole in milk are less than 5% of the dose for infants over 2 motnhs of age. In healthy, fullterm infants it appears acceptable to use sulfamethoxazole and trimethoprim during breastfeeding after the newborn period. The time of greatest risk for hemolysis in fullterm newborns without glucose-6-phosphate dehydrogenase (G6PD) deficiency might be as short as 8 days after birth.[1] Until further data are accumulated, alternate agents should probably be used in jaundiced, ill, stressed or premature infants, because of the risk of bilirubin displacement and kernicterus. Sulfamethoxazole and trimethoprim should be avoided while breastfeeding a G6PD-deficient infant.[2,3]

### Drug Levels

Maternal Levels. In 20 mothers in the immediate postpartum period given oral trimethoprim, peak milk levels occurred 3 hours after the dose. In 14 of these women who received a daily dosage of 320 mg, the peak milk level averaged 2.4 mg/L and the trough averaged 1 mg/L. In 6 other women who received a daily dosage of 480 mg, the peak milk level averaged 4 mg/L and the trough averaged 1.5 mg/L. The authors calculated that a breastfed infant would receive a daily dosage of 0.75 mg with a maternal dosage of 320 mg daily and 1.7 mg with a maternal dosage of 480 mg.[4,5]

Forty women who were 5 or fewer days postpartum period received oral co-trimoxazole equivalent to 800 mg of sulfamethoxazole and 320 mg of trimethoprim twice daily. Another 10 women were given this dose 3 times daily. Milk levels were measured several times daily for 5 days. After trimethoprim doses of 320 mg daily, average milk levels were about 2 mg/L in both groups. Milk levels increased to about 3 mg/L by day 5 of therapy. Average sulfamethoxazole milk levels were 4.5 and 5.3 mg/L, respectively, with the 2 doses.[6] With the usual dose of trimethoprim 320 mg and sulfamethoxazole 800 mg daily, an exclusively breastfed infant would be expected to receive 0.45 mg/kg daily of trimethoprim and 0.68 mg/kg daily of sulfamethoxazole. This is very low in comparison to the established treatment dosages of 8 mg/kg and 40 mg/kg daily for infants over 2 months of age.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

An extensive systematic review of the use of sulfonamides near term and during breastfeeding found no adverse reactions in infants. The authors concluded that use of sulfamethoxazole-trimethoprim during breastfeeding presents no risk of neonatal kernicterus.[7]

A prospective, controlled study asked mothers who called an information service about adverse reactions experience by their breastfed infants. Of 12 women who took sulfamethoxazole and trimethoprim during breastfeeding (time postpartum and dosage not stated), none reported diarrhea, drowsiness or irritability in her infant. Two mothers reported poor feeding in their infants.[8]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Zao J, Koren G, Bozzo P. Using nitrofurantoin while breastfeeding a newborn. Can Fam Physician 2014;60:539-40.24925943
2 Chung AM, Reed MD, Blumer JL. Antibiotics and breast-feeding: A critical review of the literature. Paediatr Drugs 2002;4:817-37.12431134
3 Farahnik B, Murase JE. Antibiotic safety considerations in methicillin-resistant Staphylococcus aureus postpartum mastitis. J Am Acad Dermatol 2016;75:e149.27646759
4 Arnauld R, Soutoul JH, Gallier J, et al. [Study on the passage of trimethoprim into mother's milk]. Ouest Med 1972;25:959-64.
5 Borderon E, Soutoul JH, Borderon JC, et al. [Excretion of antibiotics in human milk]. Med Mal Infect 1975;5:373-6.
6 Miller RD, Salter AJ. The passage of trimethoprim/sulfamethoxazole into breast milk and its significance. In, Daikos CK, ed. Progress in Chemotherapy. Antibacterial chemotherapy 1974;1:687-91.
7 Forna F, McConnell M, Kitabire FN, et al. Systematic review of the safety of trimethoprim-sulfamethoxazole for prophylaxis in HIV-infected pregnant women: Implications for resource-limited settings. AIDS Rev 2006;8:24-36.16736949
8 Ito S, Blajchman A, Stephenson M, et al. Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393-9.8498418

## Substance Identification

### Substance Name

Trimethoprim-Sulfamethoxazole

### CAS Registry Number

8064-90-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Anti-Infective Agents, Urinary

Antibacterial Agents

Folic Acid Antagonists

Sulfonamides